# Bretylium

CASRN: 59-41-6

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Bretylium is no longer marketed. Because there is little published experience with bretylium during breastfeeding, its high frequency of side effects, and its lack of availability, other agents are preferred.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A dose of 400 mg of bretylium tosylate every 8 hours was taken orally by one mother while nursing a newborn. She was also taking atenolol 25 mg daily, propranolol 20 mg three times a day, spironolactone 75 mg every other day and multivitamin, potassium and magnesium supplements. Jaundice, thought to be unrelated to the drug, occurred at 60 hours of age, but resolved. The infant had appropriate weight gain and development during the first 4 months of life.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1. Gutgesell M, Overholt E, Boyle R. Oral bretylium tosylate use during pregnancy and subsequent breastfeeding: A case report. Am J Perinatol. 1990;7:144-5.2331276

## Substance Identification

### Substance Name

Bretylium

### CAS Registry Number

59-41-6

### Drug Class

- Breast Feeding
- Lactation
- Antiarrhythmics